# Rifampin

CASRN: 13292-46-1

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that there are low levels of rifampin in breastmilk that would not be expected to cause any adverse effects in breastfed infants. The amount of rifampin in milk is insufficient to treat tuberculosis in the breastfed infant. The Centers for Disease Control and Prevention and other professional organizations state that breastfeeding should not be discouraged in women taking rifampin.[1-3] Breastmilk may be stained a yellow, orange, red or brown color.

### Drug Levels

Maternal Levels. One old study reported that after a single oral dose of rifampin of 150 mg, milk levels 4 hours after the dose ranged from 0 to 1.8 mg/L. After a single oral dose of 450 mg, milk levels 12 hours after the dose ranged from 3.4 to 4.9 mg/L.[4] Details of the study and patients were not stated.

A physiologically based pharmacokinetic model of rifampin predicted that a fully breastfed infant would receive a dose of 0.4 mg/kg daily with a maternal dosage of 10.9 mg/kg daily, which is 3.7% of the weight-adjusted maternal dosage.[5]

Six nursing mothers who were taking oral rifampin 600 mg daily for tuberculosis provided milk samples at 2, 4, 6, and 8 hours after a directly observed dose on two occasions at steady state. The median peak milk levels were 0.99 and 0.92 mg/L at 3.2 and 4.7 hours after the dose, respectively. Average milk levels over 24 hours were 0.28 and 0.3 mg/L, respectively, o, one at n the two occasions.[6] The values in this study equate to a relative infant dose of about 0.4%.

Infant Levels. Measured infant serum levels have not been reported. A physiologically based pharmacokinetic model of rifampin predicted that a fully breastfed infant would achieve a maximum serum concentration of about 0.2 mg/L with a maternal dose of 10.9 mg/kg daily.[5]

Six nursing mothers were taking oral rifampin 600 mg daily for tuberculosis. Each of their infants had heel sticks for obtaining blood samples twice, once just before the maternal dose and another at a time within 8 hours after the maternal dose. Rifampin was undetectable (<0.117 mg/L) in the plasma of all but one infant who had a concentration of 2.93 mg/L at 6 hours after the maternal dose on one occasion. That infant’s mother had an unexpectedly high milk rifampin level.[6]

### Effects in Breastfed Infants

One woman taking rifampin 450 mg, isoniazid 300 mg and ethambutol 1200 mg daily during pregnancy and rifampin 450 mg and isoniazid 300 mg for the first 7 months of lactation (extent not stated). The infant was born with mildly elevated serum liver enzymes which persisted for to 1 (alanine transferase) to 2 years (aspartate transaminase), but had no other adverse reactions.[7]

Rifampin was used as part of multi-drug regimens to treat 2 pregnant women with multidrug-resistant tuberculosis throughout pregnancy and postpartum. Their two infants were breastfed (extent and duration not stated). At age 3.9 and 5.1 years, the children were developing normally except for hyperactivity in one.[8]

Two mothers in Türkiye were diagnosed with tuberculosis at the 30th and 34th weeks of pregnancy. They immediately started isoniazid 300 mg, rifampin 600 mg, pyridoxine 50 mg daily for 6 months, plus pyrazinamide 25 mg/kg and ethambutol 25 mg/kg daily for 2 months. Both mothers breastfed their infants (extent not stated). Their infants were given isoniazid 5 mg/kg daily for 3 months prophylactically. Tuberculin skin tests were negative after 3 months and neither infant had tuberculosis at 1 year of age. No adverse effects of the drugs were mentioned.[9]

A woman with leprosy took clofazimine, dapsone and rifampin during pregnancy and breastfeeding. Her infant developed skin discoloration attributed to clofazimine which reversed 3 months after cessation of breastfeeding.[10]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Methicillin-resistant Staph. aureus) Doxycycline, Minocycline, Trimethoprim-Sulfamethoxazole, Vancomycin; (M. tuberculosis) Rifapentine

### References

1 Blumberg H, Burman W, Chaisson R, et al. American Thoracic Society/Centers for Disease Control and Prevention/Infectious Diseases Society of America: Treatment of tuberculosis. Am J Respir Crit Care Med 2003;167:603-62.12588714
2 Anon. Treatment of tuberculosis. MMWR Recomm Rep 2003;52:1-77.12836625
3 Bartlett J. Guidelines section. Infect Dis Clin Pract 2002;11:467-71.
4 Lenzi E, Santauri S. Preliminary observations on the use of a synthetic rifamycin derivative. Atti Accad Lancisiana Roma 1969;13 (Suppl 1):87-94.
5 Partosch F, Mielke H, Stahlmann R, et al. Exposure of nursed infants to maternal treatment with ethambutol and rifampicin. Basic Clin Pharmacol Toxicol 2018;123:213-20.29505119
6 Kawuma A, Ojara F, Buzibye A, et al. Interim analysis, a tool to enhance efficiency of pharmacokinetic studies: Pharmacokinetics of rifampicin in lactating mother-infant pairs. CPT Pharmacometrics Syst Pharmacol 2024;13:1915-23.39356094
7 Peters C, Nienhaus A. Fallbericht einer beruflich erworbenen tuberkulose in der schwangerschaft. Pneumologie 2008;62:695-8.18855309
8 Drobac P, del Castillo H, Sweetland A, et al. Treatment of multidrug-resistant tuberculosis during pregnancy: Long-term follow-up of 6 children with intrauterine exposure to second-line agents. Clin Infect Dis 2005;40:1689-92.15889370
9 Keskin N, Yilmaz S. Pregnancy and tuberculosis: To assess tuberculosis cases in pregnancy in a developing region retrospectively and two case reports. Arch Gynecol Obstet 2008;278:451-5.18273625
10 Ozturk Z, Tatliparmak A. Leprosy treatment during pregnancy and breastfeeding: A case report and brief review of literature. Dermatol Ther 2017;30:e12414.27549245

## Substance Identification

### Substance Name

Rifampin

### CAS Registry Number

13292-46-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antitubercular Agents

Leprostatic Agents

Rifamycins